# Technetium Tc 99m Albumin

CASRN: 877003-93-5

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of technetium Tc 99m aggregated albumin (Tc 99m albumin colloid; Tc 99m microalbumin; Tc 99m HAM) as a diagnostic agent. A US Nuclear Regulatory Commission subcommittee has recommended that nursing be discontinued for 24 hours after administration of all technetium Tc 99m diagnostic products to simplify guidance recommendations, although this time interval may be longer than necessary.[1] Other sources recommend that breastfeeding should be interrupted for 12 to 13 hours after administration of Tc 99m albumin aggregated, although one source recommends a discontinuation period of 20 hours after a dose of 200 MBq.[2-6] If the mother has expressed and saved milk prior to the examination, she can feed it to the infant during the period of nursing interruption.[5,7,8] Mothers need not refrain from close contact with their infants after usual clinical doses. However, reducing close contact with the child to the least possible time for 6 hours following injection of the radiopharmaceutical, will ensure that the exposure is "as low as reasonably achievable".

Mothers concerned about the level of radioactivity in their milk could ask to have it tested at a nuclear medicine facility at their hospital. When the radioactivity is at a safe level, she may resume breastfeeding. A method for measuring milk radioactivity and determining the time when a mother can safely resume breastfeeding has been published.[9]

For nursing mothers who work with Tc 99m substances in their workplace, there is no need to take any precautions other than those appropriate for general radiation protection.[10]

### Drug Levels

Tc 99m is a gamma emitter with a principal photon energy of 140 keV and a physical half-life of 6.04 hours.[1]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Dilsizian V, Metter D, Palestro C, Zanzonico P. Advisory Committee on Medical Uses of Isotopes (ACMUI) Sub-Committee on Nursing Mother Guidelines for the Medical Administration of Radioactive Material. Final report submitted: January 31, 2019. 2019. https://www.nrc.gov/docs/ML1903/ML19038A498.pdf
2 Burkhart M, Cockerham A, Cook J, et al. NUREG-1556, Volume 9, Revision 3. Consolidated guidance about materials licenses. Program-specific guidance about medical use licenses. US Nuclear Regulatory Commission Office of Nuclear Material Safety and Safeguards 2019. http://www.nrc.gov/reading-rm/doc-collections/nuregs/staff/sr1556/v9/r2/
3 Leide-Svegborn S, Ahlgren L, Johansson L, Mattsson S. Excretion of radionuclides in human breast milk after nuclear medicine examinations. Biokinetic and dosimetric data and recommendations on breastfeeding interruption. Eur J Nucl Med Mol Imaging 2016;43:808-21.26732471
4 International Atomic Energy Agency. Radiation Protection and Safety in Medical Uses of Ionizing Radiation, IAEA Safety Standards Series No. SSG-46, IAEA, Vienna. 2018. https://www.iaea.org/publications/11102/radiation-protection-and-safety-in-medical-uses-of-ionizing-radiation
5 ARSAC notes for guidance: Good clinical practice in nuclear medicine. Notes for guidance on the clinical administration of radiopharmaceuticals and use of sealed radioactive sources. 2020. https://www.gov.uk/government/publications/arsac-notes-for-guidance
6 Mitchell KB, Fleming MM, Anderson PO, Giesbrandt JG. ABM Clinical Protocol #30: Radiology and nuclear medicine studies in lactating women. Breastfeed Med 2019;14:290-4.31107104
7 Mountford PJ, Coakley AJ. A review of the secretion of radioactivity in human breast milk: Data, quantitative analysis and recommendations. Nucl Med Commun 1989;10:15-27.2645546
8 Early PJ, Sodee DB. Principles and practice of nuclear medicine. 2nd ed. St Louis Mosby-Year Book, Inc 1995:1380-1.
9 Stabin MG, Breitz HB. Breast milk excretion of radiopharmaceuticals: Mechanisms, findings, and radiation dosimetry. J Nucl Med 2000;41:863-73.10809203
10 Almén A, Mattsson S. Radiological protection of foetuses and breast-fed children of occupationally exposed women in nuclear medicine - Challenges for hospitals. Phys Med 2017;43:172-7.28882410

## Substance Identification

### Substance Name

Technetium Tc 99m Albumin

### CAS Registry Number

877003-93-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Radiopharmaceuticals

Technetium Compounds

Diagnostic Agents